# Euphorbia

## Drug Levels and Effects

### Summary of Use during Lactation

There are over 2000 species of Euphorbia containing numerous chemical compounds, although no specific active ingredients have been identified. Several Euphorbia species have been used as galactogogues in various cultures, such as Euphorbia lancifolia (called ixbut in the local language) by the Mayans in Guatemala,[1] Euphorbia hirta and Euphorbia fusiformis in India, Indonesia and Angola,[2–7] Euphorbia serpyllifolia and other species by American Indians and Euphorbia thymifolia in India and Indonesia.[5] Euphorbia hirta and Euphorbia thymifolia are used to improve the quality of colostrum in Indonesia.[8] No scientifically valid clinical trials support these uses; however, some evidence in animals found that a Euphorbia extract increases serum prolactin.[9] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[10,11] No data exist on the excretion of any components of Euphorbia into breastmilk. Euphorbia species exude a white sap, which is likely the reason for its use as a galactogogue via the “doctrine of signatures”.[5] The sap can cause contact sensitization and ocular toxicity if it gets in the eye. Taken orally, Euphorbia can cause nausea and vomiting.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Animal studies have demonstrated an increase in serum prolactin after administration of an extract of Euphorbia hirta and Euphorbia fusiformis.[7,9]

### References

1 Rosengarten F, Jr. A neglected Mayan galactagogue - ixbut (Euphorbia lancifolia). J Ethnopharmacol 1982;5:91–112.7033669
2 Sayed NZ, Deo R, Mukundan U. Herbal remedies used by Warlis of Dahanu to induce lactation in nursing mothers. Indian J Tradit Knowl 2007;6:602–5. https://nopr.niscpr.res.in/handle/123456789/1009
3 Rajith NP, Navas M, Muhammad Thata A, . A study on traditional mother care plants of rural communities of South Kerala. Indian J Tradit Knowl 2010;9 (Sp. Iss. 1):203–8. https://nopr.niscpr.res.in/bitstream/123456789/7183/1/IJTK%209%281%29%20203-208.pdf
4 Jendras G, Monizi M, Neinhuis C, . Plants, food and treatments used by BaKongo tribes in Uíge (northern Angola) to affect the quality and quantity of human breast milk. Int Breastfeed J 2020;15:88.33097071
5 Sibeko L, Johns T. Global survey of medicinal plants during lactation and postpartum recovery: Evolutionary perspectives and contemporary health implications. J Ethnopharmacol 2021;270:113812.33450288
6 Dandotiya H, Singh G, Kashaw SK. The galactagogues use by Indian tribal communities to over come poor lactation. Int J Biotechnol Bioeng Res 2013;4:243–8. http://www.ripublication.com/Volume/ijbbrv4n3spl.htm
7 Ozarde YS, Choudhari VP. Euphorbia fusiformis: A rare, versatile species - A review. Int J Pharm Sci Res 2021;12:4086–100. doi:10.13040/IJPSR.0975-8232.12(8).4086-00
8 Panjaitan RGP, Aprilianti M, Titin, . Genetic potential of medicinal plants and their role in improving colostrum production in Dayak Kanayatn tribe, Bengkayang Regency, Indonesia. Sabrao Journal of Breeding and Genetics 2025;57:115–25. doi:10.54910/sabrao2025.57.1.12
9 Sawadogo L, Thibault JF, Rouau X, . The lactogenic action of plant extracts. In, Martinet J, Houdebine LM, Herbert H, eds. Biology of lactation Paris Institut National de la Research Agrono 1999:553–64.
10 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
11 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531

## Substance Identification

### Substance Name

Euphorbia

### Scientific Name

Euphorbia sp.

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal